# Warfarin

CASRN: 81-81-2

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the very low milk levels with warfarin doses up to at least 12 mg daily, amounts ingested by the infant are small. No adverse reactions in breastfed infants have been reported from maternal warfarin use during lactation, even with a dose of 25 mg daily for 7 days. There is a consensus that maternal warfarin therapy during breastfeeding poses little risk to the breastfed infant.[1,2] No special precautions are necessary.

Women’s postpartum warfarin dosage requirements may be increased by as much as two-fold compared to prepregnancy requirements. Whether breastfeeding contributes to the increased requirement is unclear.[3]

### Drug Levels

Maternal Levels. Warfarin was not detected (<25 mcg/L) at 4 hours after a dose in the breastmilk of 13 mothers who were 3 to 12 days postpartum and anticoagulated with warfarin in doses of 2 to12 mg daily in one study.[4]

Warfarin activity was also not detected in the milk of 2 anticoagulated women (warfarin dose unspecified).[5]

Infant Levels. No warfarin activity was detected in the plasma of any of 7 infants in whom it was measured. Measures of anticoagulation were within normal limits in all infants tested.[5]

### Effects in Breastfed Infants

No decreases in vitamin K-dependent clotting factors or bleeding occurred in 2 infants who were breastfed for 56 and 131 days, respectively, during maternal anticoagulation with warfarin.[4]

In one telephone follow-up study, mothers taking warfarin reported no adverse effects among 5 breastfed infants.[6]

A mother had been taking warfarin 5 mg daily for the first 7 weeks postpartum for a pulmonary embolism. At this time, she began taking 25 mg daily by mistake and took this dose for 7 days. Upon presentation to the emergency room, her INR was greater than 10 (usual therapeutic maximum 3.5), her prothrombin time was greater than 100 seconds (normal up to 11.2 seconds), and her aPTT was 62.5 seconds (normal up to 32.7 seconds). She had been nearly exclusively breastfeeding her infant since birth. Her 8-week-old infant was healthy with an INR of 1.0, prothrombin time of 10.3 seconds, and a slightly elevated aPTT 33.8 seconds. However, 3 weeks previously, the infant's aPTT was 38.9 seconds, so the elevated aPTT was judged not to be caused by warfarin.[7]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acenocoumarol, Dalteparin, Enoxaparin, Heparin, Rivaroxaban, Warfarin

### References

1 Clark SL, Porter TF, West FG. Coumarin derivatives and breast-feeding. Obstet Gynecol 2000;95 (6 pt 1):938-40.10831996
2 Bates SM, Rajasekhar A, Middeldorp S, et al. American Society of Hematology 2018 guidelines for management of venous thromboembolism: Venous thromboembolism in the context of pregnancy. Blood Adv 2018;2:3317-59.30482767
3 Uppuluri E, Idrees N, Shapiro N. Warfarin dosage in a postpartum woman while breastfeeding: A case report. Pharmacotherapy 2024;44:343–7.38634189
4 Orme ML, Lewis PJ, De Swiet M, et al. May mothers given warfarin breast-feed their infants? Br Med J 1977;1:1564-5.871666
5 McKenna R, Cole ER, Vasan U. Is warfarin sodium contraindicated in the lactating mother? J Pediatr 1983;103:325-7.6410034
6 Ito S, Blajchman A, Stephenson M, et al. Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393-9.8498418
7 Schindler D, Graham TP. Warfarin overdose in a breast-feeding woman. West J Emerg Med 2011;12:216-7.21691530

## Substance Identification

### Substance Name

Warfarin

### CAS Registry Number

81-81-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticoagulants